# Clofazimine

CASRN: 2030-63-9

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that clofazimine appears in milk in relatively large amounts. Human milk enhances the solubilization and possibly the absorption of clofazimine in infants.[1,2] Milk can be colored pink to red by the drug and breastfed infant's skin can be discolored the typical red color that is common in persons taking the drug.[3-5] No serious or permanent toxicity has been reported in breastfed infants; however, an alternate drug might be considered.

### Drug Levels

Maternal Levels. Eight women with leprosy who had been breastfeeding for 4 months or less had been receiving clofazimine either 50 mg daily (n = 5), 100 mg every other day (n = 2) or 100 mg daily (n = 1) for an average of 5 months. Milk levels collected 4 to 6 hours after the dose averaged 1.33 mg/L (range 0.8 to 1.7 mg/L). Infants received an average of 0.199 mg/kg daily (range 0.17 to 0.26 mg/kg daily) which averaged 22.1% (range 13.5 to 30%) of the maternal weight-adjusted dosage.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Probable cases of skin discoloration in breastfed infants whose mothers were taking clofazimine have been reported. In one infant, red skin color was reported.[1] In another (exact maternal dosage not stated, but in the range of 100 to 300 mg daily), the infant's skin color was reported as ruddy and slightly hypermelanotic; this infant's skin color returned to normal 5 months after the end of maternal therapy.[5]

Clofazimine was used as part of a six-drug regimen to treat a pregnant woman with multidrug-resistant tuberculosis during the first trimester of pregnancy and postpartum. The infant was breastfed (extent and duration not stated). At age 1.8 years, the child had failure to thrive, possibly due to tuberculosis contracted after birth, but was otherwise developing normally. The child also had bronze coloration of the skin color which faded over time.[7]

A woman with leprosy took clofazimine, dapsone and rifampin during pregnancy and breastfeeding. Her infant developed skin discoloration attributed to clofazimine which reversed 3 months after cessation of breastfeeding.[8]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Leprosy) Dapsone (Cryptosporidiosis) Nitazoxanide, Paromomycin

### References

1 Ponsonby-Thomas E, Salim M, Klein LD, et al. Evaluating human milk as a drug delivery vehicle for clofazimine to premature infants. J Control Release 2023;362:257-67.37619865
2 Ponsonby-Thomas E, Pham AC, Huang S, et al. Human milk improves the oral bioavailability of the poorly water-soluble drug clofazimine. Eur J Pharm Biopharm 2025;207:114604.39675684
3 Freerksen E, Seydel JK. Critical comments on the treatment of leprosy and other mycobacterial infections with clofazimine. Arzneimittelforschung 1992;42:1243-5.1472145
4 Waters MFR. G 30 320 or B 663--Lampren (Geigy). A working party held at the Royal Garden Hotel London, September 1968. Lepr Rev 1969;40:21-47.4888382
5 Browne SG, Hogerzeil LM. "B 663" in the treatment of leprosy: Preliminary report of a pilot trial. Lepr Rev 1962;33:6-10.13873759
6 Venkatesan K, Mathur A, Girdhar A, et al. Excretion of clofazimine in human milk in leprosy patients. Lepr Rev 1997;68:242-6.9364825
7 Drobac PC, del Castillo H, Sweetland A, et al. Treatment of multidrug-resistant tuberculosis during pregnancy: Long-term follow-up of 6 children with intrauterine exposure to second-line agents. Clin Infect Dis 2005;40:1689-92.15889370
8 Ozturk Z, Tatliparmak A. Leprosy treatment during pregnancy and breastfeeding: A case report and brief review of literature. Dermatol Ther 2017;30:e12414.27549245

## Substance Identification

### Substance Name

Clofazimine

### CAS Registry Number

2030-63-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Leprostatic Agents